# Celecoxib

CASRN: 169590-42-5

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of celecoxib in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants.[1] No special precautions are required.

### Drug Levels

Maternal Levels. Milk celecoxib levels were measured in one mother taking 100 mg orally twice daily. At 4.75 hours after the fourth dose, milk levels were 101 and 133 mcg/L from her right and left breasts, respectively. A second peak level of about 30 mcg/L occurred in milk from the right breast about 35 hours after the last dose. The average half-life in the milk was 5.1 hours. The authors estimated that a fully breastfed infant would receive a maximum dose of 40 mcg/kg daily.[2]

Three mothers, averaging 12 months postpartum, who had been taking oral celecoxib 200 mg daily (average 3.27 mg/kg daily) for several weeks had milk celecoxib levels measured at several times during a 24-hour period. Peak milk levels averaged 139 mcg/L at 2 hours after the dose. By 12 hours after the dose, celecoxib was undetectable (<10 mcg/L) in milk. Two other mothers were given a single oral dose of celecoxib 200 mg. Breastmilk and maternal serum were collected periodically over an 8-hour period. Peak milk levels were 170 mcg/L at 4 hours after the dose in one woman and 269 mcg/L at 2 hours after the dose in the other.[3] Based on data from these 5 women, an exclusively breastfed infant would receive an estimated 9.8 mcg/kg daily or 0.3% of the maternal weight-adjusted dosage.

Six women averaging 11 months postpartum (range 6.5 to 15 months) were given a single 200 mg dose of celecoxib orally. Milk samples were collected for 48 hours after the dose. A median peak milk level of 200 mcg/L (range 70 to 330 mcg/L) occurred 2 to 4 hours after the dose. The authors calculated that a fully breastfed infant would receive a median daily dosage of 13 mcg/kg (range 11 to 210 mcg/kg) or 0.23% of the maternal weight-adjusted dosage.[4]

Thirteen nonlactating women took celecoxib 200 or 400 mg twice daily for 2 weeks followed by collection of nipple aspirate fluid. Two women taking 200 mg twice daily had celecoxib concentrations of 1.2 and 1.5 mg/L; 2 women taking 400 mg twice daily had celecoxib concentrations of 0.53 and 8.4 mg/L in the aspirate. Celecoxib was undetectable (lower limit of assay not stated) in the in nipple aspirate fluid of the other 9 women. Collection times with respect to the doses were not stated.[5]

Infant Levels. Two breastfed infants whose mothers had been taking celecoxib 200 mg orally twice daily for many weeks, had blood samples taken 4 hours after a maternal dose. The infants were 17 and 22 months of age and were breastfed on demand every 3 to 4 hours during the day and once at night. Celecoxib was undetectable (<10 mcg/L) in the plasma of these infants.[3]

### Effects in Breastfed Infants

No infant side effects were noted by the mothers of 2 infants aged 17 and 22 months who were breastfed during long-term maternal use of celecoxib 200 mg daily.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Flurbiprofen, Ibuprofen, Indomethacin, Piroxicam

### References

1 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025.40287311
2 Knoppert DC, Stempak D, Baruchel S, et al. Celecoxib in human milk: A case report. Pharmacotherapy 2003;23:97–100.12523466
3 Hale TW, McDonald R, Boger J. Transfer of celecoxib into human milk. J Hum Lact 2004;20:397–403.15479658
4 Gardiner SJ, Doogue MP, Zhang M, et al. Quantification of infant exposure to celecoxib through breast milk. Br J Clin Pharmacol 2006;61:101–4.16390357
5 Ruhlen RL, Chen YC, Rottinghaus GE, et al. RE: "Transfer of celecoxib into human milk". J Hum Lact 2007;23:13–4.17293545

## Substance Identification

### Substance Name

Celecoxib

### CAS Registry Number

169590-42-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal